# Peginterferon Alfa

CASRN: 198153-51-4; 215647-85-1

## Drug Levels and Effects

### Summary of Use during Lactation

Peginterferon alfa is unmeasurable in human milk. In addition, because interferon is poorly absorbed orally, it is not likely to reach the bloodstream of the infant. Polyethylene glycol is not excreted into breastmilk.[1] It is unlikely that peginterferon alfa use by a nursing mother presents any serious risk to the breastfed infant.

For use in treating maternal hepatitis B, no differences exist in infection rates between breast-fed and formula-fed infants born to hepatitis B-infected women, as long as the infant receives hepatitis B immune globulin and hepatitis B vaccine at birth. Mothers with hepatitis B are encouraged to breastfeed their infants after their infants receive these preventative measures.[2,3]

Hepatitis C is not transmitted through breastmilk and breastmilk has been shown to inactivate hepatitis C virus (HCV).[4-7] However, the Centers for Disease Control recommends that mothers with HCV infection should consider abstaining from breastfeeding if their nipples are cracked or bleeding. It is not clear if this warning would apply to mothers who are being treated for hepatitis C.

Infants born to mothers with HCV infection should be tested for HCV infection; because maternal antibody is present for the first 18 months of life and before the infant mounts an immunologic response, nucleic acid testing is recommended.[4,7]

### Drug Levels

No information is available specifically on peginterferon alfa. However, data are available on non-pegylated interferon alfa.

Maternal Levels. Two mothers taking interferon alfa had milk levels measured. One mother taking 8 million units three times a week had a milk level of 1400 units/L and another taking 8 million units daily had a milk level of 6000 units/L. Both levels were apparently measured immediately postpartum (in colostrum), but the time since the previous dose was not stated.[8]

An intravenous dose of 30 million units of interferon alfa-2B in one woman resulted in a peak milk level of 1551 International Units/L which was a slight increase over two baseline levels prior to the dose which averaged 1072 International Units/L. By 12 hours after the dose, milk interferon levels were lower than baseline.[9]

Two patients, one from the United States and one from Taiwan, were receiving ropeginterferon alfa-2b during pregnancy and postpartum for essential thrombocytopenia. The one from the US was receiving 100 mcg every 2 weeks, with the last dose 3 days before delivery. Four breastmilk samples had no detectable (<0.1 mcg/L) levels of ropeginterferon alfa-2b. The woman from Taiwan was receiving 500 mcg every 2 weeks, with the last dose 3 days before delivery. Four milk samples contained no quantifiable ropeginterferon alfa-2b (<5 ng/L), but a colostrum sample had a slight signal.[10]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One infant was born to a mother who received 3 million units of interferon alfa-2a subcutaneously 3 times weekly during pregnancy and postpartum for essential thrombocytopenia. Her infant was breastfed for 2 weeks postpartum before bilateral mastitis caused the mother to terminate nursing. The infant reportedly thrived, although specific measures were not mentioned.[11]

Two infants were reported whose mothers were receiving peginterferon-alpha for chronic myeloid leukemia. One breastfed safely for 2 months and the other for 4 months.[12]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis B) Lamivudine, Tenofovir; (Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Sofosbuvir

### References

1 Clowse ME, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890–6.28814432
2 Visvanathan K, Dusheiko G, Giles M, et al. Managing HBV in pregnancy. Prevention, prophylaxis, treatment and follow-up: Position paper produced by Australian, UK and New Zealand key opinion leaders. Gut 2016;65:340–50.26475631
3 Dionne-Odom J, Tita AT, Silverman NS. #38: Hepatitis B in pregnancy screening, treatment, and prevention of vertical transmission. Am J Obstet Gynecol 2016;214:6–14.26454123
4 Cottrell EB, Chou R, Wasson N, et al. Reducing risk for mother-to-infant transmission of hepatitis C virus: A systematic review for the U.S. Preventive Services Task Force. Ann Intern Med 2013;158:109–13.23437438
5 Pfaender S, Heyden J, Friesland M, et al. Inactivation of hepatitis C virus infectivity by human breast milk. J Infect Dis 2013;208:1943–52.24068703
6 Tovo PA, Calitri C, Scolfaro C, et al. Vertically acquired hepatitis C virus infection: Correlates of transmission and disease progression. World J Gastroenterol 2016;22:1382–92.26819507
7 Workowski KA, Bachmann LH, Chan PA, et al. Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1–187.34292926
8 Haggstrom J, Adriansson M, Hybbinette T, et al. Two cases of CML treated with alpha-interferon during second and third trimester of pregnancy with analysis of the drug in the new-born immediately postpartum. Eur J Haematol 1996;57:101–2.8698119
9 Kumar AR, Hale TW, Mock RE. Transfer of interferon alfa into human breast milk. J Hum Lact 2000;16:226–8.11153157
10 Tashi T, Shih LY, Yo YT, et al. Ropeginterferon alfa-2b has minimal transplacental passage and breastmilk secretion in pregnant MPN patients. Blood Adv 2026;10:2168–72.41587484
11 Williams JM, Schlesinger PE, Gray AG. Successful treatment of essential thrombocythaemia and recurrent abortion with alpha interferon. Br J Haematol 1994;88:647–8.7819084
12 Abruzzese E, Chelysheva E. How I manage chronic myeloid leukemia during pregnancy. Blood 2026;147:347–56.40758938

## Substance Identification

### Substance Name

Peginterferon Alfa

### CAS Registry Number

198153-51-4; 215647-85-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

Biological Response Modifiers

Antineoplastic Agents